# Flurazepam

CASRN: 17617-23-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the excretion of flurazepam into breastmilk. One case of infant sedation was reported in a woman taking flurazepam along with other sedating drugs during breastfeeding. Because of the long duration of action of flurazepam, an alternate hypnotic is preferred, especially while nursing a newborn or preterm infant. If flurazepam is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. One mother who was taking flurazepam (dose unclear), clonazepam 0.25 mg twice daily, 1 mg of bupropion daily, and 0.75 mg of risperidone daily reported sedation in her breastfed infant.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Kelly LE, Poon S, Madadi P, et al. (2012). Neonatal benzodiazepines exposure during breastfeeding. J Pediatr.

## Substance Identification

### Substance Name

Flurazepam

### CAS Registry Number

17617-23-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Benzodiazepines

Hypnotics and Sedatives